# Zuclopenthixol

CASRN: 53772-83-1

## Drug Levels and Effects

### Summary of Use during Lactation

Zuclopenthixol is not approved for marketing in the United States, by the U.S. Food and Drug Administration, but is available in other countries. Limited information indicates that maternal oral doses of up to 50 mg daily or depot injections of 72 mg every 2 weeks produce low levels in breastmilk and no detectable short-term adverse effects in the breastfed infants. No long-term data are available. One international guideline recommends that women taking zuclopenthixol not breastfeed.[1] However, a safety scoring system finds zuclopenthixol possible to use cautiously during breastfeeding.[2] Until more data are available, zuclopenthixol should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Six women received zuclopenthixol during nursing. Five of the women were receiving the drug orally and one was receiving a depot injection. Oral dosages ranged from 4 to 50 mg daily of zuclopenthixol and the depot decanoate injection dosage was 72 mg every 2 weeks. Milk samples were obtained in the morning before the first oral dose of the day. Milk zuclopenthixol concentrations for 5 of the patients were between 1 and 2 mcg/L. The patient receiving the high oral dose of 50 mg daily had a breastmilk zuclopenthixol level of about 9 mcg/L.[3]

One woman received zuclopenthixol for depression beginning 2 weeks postpartum. She initially received a dose of 24 mg daily (4 mg in the morning and 20 mg at night), but the dose was reduced to 14 mg daily (4 mg in the morning and 10 mg at night) after 4 days. Seven milk samples in total were obtained on days 2, 3, 6, and 8 of therapy. The average of the milk level with the 24 mg daily dosage was 20 mcg/L and with the 14 mg daily dosage it was 5 mcg/L. The authors estimated that an exclusively breastfed infant would receive 0.8 to 3 mcg/kg daily with the maternal doses given or 0.3 to 0.8% of the maternal weight-adjusted dosage.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Six women received zuclopenthixol during nursing. Five of the women were receiving 4 to 50 mg daily by mouth and one was receiving a depot injection of 72 mg every 2 weeks. Their breastfed infants ranged in age from 3 days to 10 months old, 5 of whom were 2 months or under. No immediate adverse effects such infant drowsiness were noted.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Hasan A, Falkai P, Wobrock T, et al. (2015). World Federation of Societies of Biological Psychiatry (WFSBP) Guidelines for Biological Treatment of Schizophrenia. Part 3: Update 2015 management of special circumstances: Depression, suicidality, substance use disorders and pregnancy and lactation. World J Biol Psychiatry.
2 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
3 Aaes-Jørgensen T, Bjørndal F, Bartels U. (1986). Zuclopenthixol levels in serum and breast milk. Psychopharmacology (Berl).
4 Matheson I, Skjaeraasen J. (1988). Milk concentrations of flupenthixol, nortriptyline and zuclopenthixol and between-breast differences in two patients. Eur J Clin Pharmacol.

## Substance Identification

### Substance Name

Zuclopenthixol

### CAS Registry Number

53772-83-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Dopamine Antagonists